# Dibucaine

CASRN: 85-79-0

## Drug Levels and Effects

### Summary of Use during Lactation

Topical dibucaine has not been studied during breastfeeding, but is unlikely to affect her breastfed infant if it is applied away from the breast. However, dibucaine ointment should not be applied to the nipple area, because ingestion by infants has caused seizures, arrhythmias, cardiovascular collapse and death after direct ingestion by toddlers.[1,2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Lidocaine

### References

1 Dayan PS, Litovitz TL, Crouch BI, et al. (1996). Fatal accidental dibucaine poisoning in children. Ann Emerg Med.
2 Nelsen J, Holland M, Dougherty M, et al. (2009). Severe central nervous system and cardiovascular toxicity in a pediatric patient after ingestion of an over-the-counter local anesthetic. Pediatr Emerg Care.

## Substance Identification

### Substance Name

Dibucaine

### CAS Registry Number

85-79-0

### Drug Class

Breast Feeding

Lactation

Anesthetics, Local